# Radiotherapy

## Drug Levels and Effects

### Summary of Use during Lactation

Some expert opinion recommends not breastfeeding during radiotherapy treatment of breast cancer because the suckling effect from the infant might augment skin toxicity from radiotherapy in the treated breast(s).[1] High-dose breast radiation for the therapy of breast cancer can substantially decrease or eliminate subsequent milk production in the treated breast, but not the untreated breast. Medical professionals sometimes advise mothers who have received breast cancer surgery and radiation not to breastfeed; however, it appears that these concerns are unfounded. Lower radiation doses to the breast in the treatment of Hodgkin lymphoma appear to have only a minor effect on subsequent lactation success, but cranial irradiation for Hodgkin's lymphoma can reduce subsequent breastmilk production. Women who were treated as children with cranial radiation for leukemia or chest irradiation for malignancy often have difficulty in nursing their infants. For information on diagnostic X-rays, see the LactMed entry for X-rays.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A systematic review compiled data from 102 patients treated with breast irradiation and their subsequent lactation experience. The authors found a large variation in milk output of the irradiated breast, which may be due to the type and intensity of the radiation, or concomitant surgery. Two studies found changes in breastmilk in the irradiated breast compared to the untreated breast, including elevated sodium, and reduced potassium, phosphate and triglycerides. Most patients could breastfeed successfully using the untreated breast. Cranial irradiation for Hodgkin's lymphoma or during childhood for leukemia can also reduce subsequent breastmilk production.[2]

Twenty women were identified from the European Institute of Oncology database who had breast cancer from 1988 to 2006 who agreed to take a survey of breastfeeding behavior. Fourteen of 15 women who underwent breast conserving surgery followed by irradiation reported hypoplasia of the irradiated breast during pregnancy. Of the 15 women, eight did not attempt to breastfeed. Of the 7 who attempted breastfeeding, one woman successfully breastfed 2 infants (2 pregnancies) for more than 6 months, one other successfully breastfed for 11 months. The duration of nursing in the other 5 women is unclear in the paper. Only two women attempted to breastfeed from both breasts, and both could breastfeed from both breasts for only 2 weeks because of reduced milk production. Of the women who did not attempt breastfeeding, medical counseling against breastfeeding was a major reason because of "uncertainty regarding maternal safety", and "a priori unfeasibility" expressed either by the obstetrician or the oncologist.[3]

Of 12 women who had been treated for childhood leukemia with 24 to 25 Gy of prophylactic cranial irradiation, 10 reported an inability to breastfeed postpartum. Nine of the 12 women had an adult height more than 1 SD below their heights at diagnosis, 4 of whom were more than 2 SD below height at diagnosis; one woman had a low serum growth hormone level, all suggesting growth hormone deficiency as a possible cause of lactation failure. The 10 women who failed to lactate had minimal or no breast changes during pregnancy and did not produce any breastmilk, including 2 who used metoclopramide as a galactagogue. Two of the 10 women produced some colostrum and one produced a small amount of colostrum with only her second pregnancy Among the other women with multiple pregnancies, each attempt at lactation was similar. The two women who were able to breastfeed had no distinguishable differences from the others.[4]

A study of 44 women who were treated with cranial radiotherapy of 18 to 30 Gy as children for leukemia was conducted 8 to 20 years following radiotherapy. Forty were growth hormone deficient and 4 were growth hormone insufficient. Seven of the women became pregnant at 18 to 22 years after therapy while taking growth hormone replacement therapy. Growth hormone therapy was discontinued in the second trimester and restarted 6 months postpartum. Six of the 7 women were unable to lactate. Stimulation with thyrotropin-releasing hormone showed a lower prolactin response among women who had undergone radiotherapy than in matched controls.[5]

A retrospective cohort study was performed on women who had received high-dose chemotherapy and autologous stem-cell transplants 1 to 2 years prior to pregnancy. Of these, 24 women breastfed their infants. Six successfully breastfed their infants exclusively. Ten of 16 patients who had radiation claimed to have enough breast milk production as compared with all 8 patients who never received above the diaphragm radiotherapy.[6]

A woman who had a partial mastectomy followed by radiation therapy became pregnant and delivered a healthy infant 16 months after radiation therapy. The irradiated breast failed to produce colostrum or milk, but after a week the mother achieved near-exclusive breastfeeding using the contralateral breast.[7]

A survey of childhood cancer survivors, most of whom had received radiotherapy, found that compared to normal controls, fewer survivors planned to breastfeed or initiated breastfeeding. The median breastfeeding duration was shorter among survivors, with early undesired weaning occurring sooner in the survivor group (median 1.4 months vs 2.7 months). A higher proportion of survivors reported an unfavorable breastfeeding experience (19% vs. 7.5%) and early, undesired weaning (58% vs 45%).[8]

A systematic review of papers on childhood irradiation of the breast in doses as low as 0.3 Gy can cause breast hypoplasia and lactation impairment as young adults.[9]

A survey was given to women who had been treated for breast cancer and later became pregnant and attempted to breastfeed. Of 34 women who were treated with lumpectomy and radiation, 29 reported no milk production from the treated breast and 5 reported substantially reduced milk production.[10]

### References

1 Shachar SS, Gallagher K, McGuire K, et al. Multidisciplinary management of breast cancer during pregnancy. Oncologist 2017;22:324-34.28232597
2 Leal SC, Stuart SR, Carvalho Hde A. Breast irradiation and lactation: A review. Expert Rev Anticancer Ther 2013;13:159-64.23406557
3 Azim HA, Jr, Bellettini G, Liptrott SJ, et al. Breastfeeding in breast cancer survivors: Pattern, behaviour and effect on breast cancer outcome. Breast 2010;19:527-31.21078487
4 Johnston K, Vowels M, Carroll S, et al. Failure to lactate: A possible late effect of cranial radiation. Pediatr Blood Cancer 2008;50:721-2.17763465
5 Follin C, Link K, Wiebe T, et al. Prolactin insufficiency but normal thyroid hormone levels after cranial radiotherapy in long-term survivors of childhood leukaemia. Clin Endocrinol (Oxf) 2013;79:71-8.23167807
6 Akhtar S, Youssef I, Soudy H, et al. Prevalence of menstrual cycles and outcome of 50 pregnancies after high-dose chemotherapy and auto-SCT in non-Hodgkin and Hodgkin lymphoma patients younger than 40 years. Bone Marrow Transplant 2015;50:1551-6.26237168
7 Mohamad O, McFarlane M, Rahimi A. Absence of physiologic breast response to pregnancy and lactation after radiation therapy. Pract Radiat Oncol 2016;6:e25-6.26553113
8 Ogg S, Klosky JL, Chemaitilly W, et al. Breastfeeding practices among childhood cancer survivors. J Cancer Surviv 2020;14:586-99.32291564
9 Lo AC, Ronckers C, Aznar MC, et al. Breast hypoplasia and decreased lactation from radiation therapy in survivors of pediatric malignancy: A PENTEC comprehensive review. Int J Radiat Oncol Biol Phys 2024;119:549-59.34627655
10 Sella T, Sorouri K, Rosenberg S, et al. Breastfeeding in survivors of early breast cancer. [Abstract P5-08-06] Cancer Res 2023;8 (5 Suppl). doi:10.1158/1538-7445.SABCS22-P5-08-06

## Substance Identification

### Substance Name

Radiotherapy

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiation Therapy